# Amivantamab

CASRN: 2171511-58-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of amivantamab during breastfeeding. Because amivantamab is a large protein molecule with a molecular weight of 148,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. The manufacturer recommends avoiding breastfeeding during amivantamab use and for 3 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

amivantamab

### CAS Registry Number

2171511-58-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents, Immunological

Antibodies, Bispecific

Antibodies, Monoclonal